# Amodiaquine

CASRN: 86-42-0

## Drug Levels and Effects

### Summary of Use during Lactation

Amodiaquine is no longer marketed in the United States, but is available in other countries. No information is available on the clinical use of amodiaquine during breastfeeding. However, amounts in breastmilk appear to be low and would not be expected to cause any adverse effects in breastfed infants.

### Drug Levels

Maternal Levels. A physiologically based pharmacokinetic model predicted that the RID of amodiaquine is between 0.03% an 0.07%.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Almond LM, Abduljalil K, Pansari A, et al. PBPK-led assessment of antimalarial drug concentrations in breastmilk: A strategy for optimal use of prediction methods to guide decision making in an understudied population. CPT Pharmacometrics Syst Pharmacol 2025;14:738–50.39930940

## Substance Identification

### Substance Name

Amodiaquine

### CAS Registry Number

86-42-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Anti-infective Agents

Antiparasitic Agents

Antimalarials

Antiprotozoal Agents